# Hydroxychloroquine

CASRN: 118-42-3

## Drug Levels and Effects

### Summary of Use during Lactation

Infants exposed to hydroxychloroquine during breastfeeding receive only small amounts of the drug in breastmilk. In infants up to at least 1 year of age, careful follow-up found no adverse effects on growth, vision or hearing.[1–3] International professional guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[4–6]

When given once weekly for malaria prophylaxis, the amount of drug is not sufficient to harm the infant nor is the quantity sufficient to protect the child from malaria. Breastfeeding infants should receive the recommended dosages of hydroxychloroquine for malaria prophylaxis.[7]

### Drug Levels

Hydroxychloroquine is usually available as the sulfate salt with hydroxychloroquine constituting about 75% of the labeled dose of hydroxychloroquine sulfate. It has a half-life of over a month. Some studies have not been clear about the salt form and dosage of the products being taken and others have sampled milk after only a few doses before steady state was reached. These flaws make interpretation of some of the data difficult.

Maternal Levels. In a patient beginning therapy with 200 mg of hydroxychloroquine (salt unspecified) twice daily, the highest milk level detected was 10.6 mcg/L from 3 to 12 hours after the fourth dose. After the first 48 hours of treatment with a total dosage of 800 mg, a total of 3.2 mcg was excreted into her breastmilk. This amounted to 0.0003% of the mother’s total dosage.[8] However, it is unlikely that steady state had been reached at this time.

A woman who had been breastfeeding for 9 months began taking hydroxychloroquine sulfate 400 mg (equivalent to 310 mg hydroxychloroquine base) nightly. After 6 weeks of this regimen, steady-state milk levels were 1.46, 1.09, 1.09 and 0.85 mg/L at 2, 9.5, 14 after one dose and 17.7 hours after a dose on the next day. The authors estimated that the infant would receive 0.11 mg/kg daily or about 2% of the mother’s weight-adjusted dosage.[9]

Two women who had taken hydroxychloroquine 200 mg (probably sulfate equivalent to 150 mg of base) once or twice daily (the report is unclear) before and during pregnancy had milk levels measured after delivery. Hydroxychloroquine levels in the two mothers were 344 and 1424 mcg/L at unspecified times after a dose. The authors estimated an infant intake of 0.06 and 0.2 mg/kg daily in the two infants.[10] These authors also reported two other women who had milk hydroxychloroquine levels of 1131 and 1392 mcg/L at unreported times after unspecified doses (presumably 200 to 400 mg daily). The authors estimated that these two infants would receive no more than 0.2 mg/kg daily via breastmilk.[11]

Numerous samples of milk were obtained from 6 women who were receiving 400 mg (n = 5) or 200 mg (n = 1) of hydroxychloroquine daily. The average milk level was of 376 mcg/L (range 20–1463 mcg/L) of hydroxychloroquine and of 36 mcg/L (range 11–111 mcg/L) of desethylchloroquine. The authors estimated that a fully breastfed infant would receive 1 mg of hydroxychloroquine and 0.066 mg of desethylchloroquine daily.[12]

Thirteen women who were on long-term hydroxychloroquine donated milk samples at 7 time points between 0 and 18 hours after a dose. One woman taking 100 mg daily had an average milk hydroxychloroquine concentration of 416 mcg/L. Three women taking 100 mg twice daily had average milk concentrations ranging from 358 to 746 mcg/L. Four women taking 200 mg once daily had average milk concentrations ranging from 672 to 980 mcg/L. Five women taking 200 mg twice daily had average milk concentrations ranging from 1336 to 3269 mcg/L.[13]

Thirty-three women who had been taking hydroxychloroquine sulfate for at least one year and were exclusively breastfeeding had hydroxychloroquine milk levels determined at 5 times over a 12-hour period just before and after a dose. Samples were taken at a median of 4 (range 1 to 16) weeks postpartum. Dosages ranged from 200 mg once every two days to 200 mg twice daily, with most taking 200 mg once (24%) or twice (64%) daily. These dosages are equivalent to 155 mg and 310 mg of hydroxychloroquine base. The time to peak milk concentration ranged from 2 to 4 hours after the dose. Average milk levels were dose related, with levels ranging from 0.4 to 1.2 (mean 0.7) mg/L with 200 mg once daily and 0.5 to 3.7 (mean 1.4) mg/L with 200 mg twice daily. The estimated infant daily dosage averaged 0.2 mg/kg for the 400 mg daily dosage and 0.1 mg/kg for the lower dosages. These corresponded to weight-adjusted infant dosages of 1.9 to 3.2% of the maternal dosage. One woman taking 200 mg twice daily was found to have a relative infant dosage of 9.8% and was instructed to discontinue breastfeeding.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No adverse effects were reported in one 9-month-old breastfed infant whose mother was taking 310 mg hydroxychloroquine base daily for 6 weeks.[9]

Five mothers took hydroxychloroquine 200 mg daily during pregnancy and breastfeeding, one for 30 months. Flash electroretinograms performed on the infants were normal.[1]

Another group of investigators have reported numerous infants whose mother took hydroxychloroquine during pregnancy and were breastfed during maternal hydroxychloroquine use. An abstract reported 16 infants breastfed for 1 to 19 months and followed up at an average of 24 months (range 1 to 86 months) with no evidence of visual or hearing deficits.[14] In a letter they reported 8 breastfed infants followed up at 1, 6 and 12 months of age who had normal growth and development and who had thorough, normal eye examinations at 1 and 12 months of age.[15] In a case series, 13 mothers taking hydroxychloroquine sulfate 200 mg daily breastfed their infants for an average of 2.8 months (range 1 to 6 months). None had evidence of retinal, motor or growth abnormalities during 12 months of follow-up. The authors conclude that the benefits of breastfeeding outweigh the risk of hydroxychloroquine.[2] It appears that the 8 infants reported in the letter were included among the 13 infants in the case series, but it is unclear whether the 16 infants reported in the abstract were part of the case series.

Thirty-three women who had been taking hydroxychloroquine for at least one year and exclusively breastfeeding had hydroxychloroquine milk levels determined over a 12-hour period. Two-thirds of the women were also taking a corticosteroid. Dosages ranged from 200 mg once every two days to 200 mg twice daily. Follow-up at 1 year of the infants did not find ocular toxicity or growth abnormalities.[3]

In a cohort study, over a 10-year period 130 nursing mothers with a rheumatic disease took hydroxychloroquine during partial or exclusive breastfeeding. No mention was made of adverse effects in their infants.[16]

A woman with nephrotic syndrome took hydroxychloroquine, cyclosporine, and prednisone during pregnancy and lactation. While breastfeeding she took hydroxychloroquine 200 mg, cyclosporine 125 mg in the morning and 100 mg at night (total of 3 mg/kg daily), daily and prednisone 30 mg daily. Her twin infants began partially breastfeeding (70 to 80% breastmilk) on day 7 postpartum and she continued to breastfeed for several months. The infants gained weight normally at one month of age and had no adverse reactions in the first three months postpartum.[17]

A retrospective study was performed on data from patients with lupus erythematosus from 10 hospitals in the United Kingdom who received or did not receive hydroxychloroquine during pregnancy and lactation. One hundred fifty infants whose mothers took hydroxychloroquine during pregnancy and/or breastfeeding and were compared to 134 infants who were not exposed. Infants were followed for a median of 2.21 years. No differences in outcomes were seen between the two groups of infants, although the percentage of infants who were breastfed was not stated.[18]

A mother was taking hydroxychloroquine, topiramate, methyl prednisolone and enoxaparin. She reported that her infant of 0.1 months of age who was 25% breastfed experienced vomiting. The reaction was rated as possible or probable, but mild.[19]

### Effects on Lactation and Breastmilk

A study of 43 women with systemic lupus erythematosus and their 57 pregnancies found that the use of hydroxychloroquine to treat the disease was associated with an increased duration of breastfeeding. Among mothers taking hydroxychloroquine, 88% breastfed for more than 6 months compared to 54% of women who did not take hydroxychloroquine.[20]

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Auranofin, Etanercept, Gold Sodium Thiomalate, Infliximab, Methotrexate, Penicillamine, Sulfasalazine

### References

1 Cimaz R, Brucato A, Meregalli E, . Electroretinograms of children born to mothers treated with hydroxychloroquine during pregnancy and breast-feeding: Comment on the article by Costedoat-Chalumeau et al. Arthritis Rheum 2004;50:3056–7.15457485
2 Motta M, Tincani A, Faden D, . Follow-up of infants exposed to hydroxychloroquine given to mothers during pregnancy and lactation. J Perinatol 2005;25:86–9.15496869
3 Peng W, Liu R, Zhang L, . Breast milk concentration of hydroxychloroquine in Chinese lactating women with connective tissue diseases. Eur J Clin Pharmacol 2019;75:1547–53.31375884
4 Flint J, Panchal S, Hurrell A, . BSR and BHPR guideline on prescribing drugs in pregnancy and breastfeeding-Part I: Standard and biologic disease modifying anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2016;55:1693–7.26750124
5 Sammaritano LR, Bermas BL, Chakravarty EE, . 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
6 Rüegg L, Pluma A, Hamroun S, . EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
7 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2026: Health Information for International Travel. 2026. https://www.cdc.gov/yellow-book/hcp/travel-associated-infections-diseases/malaria.html#treatment
8 Østensen M, Brown ND, Chiang PK, . Hydroxychloroquine in human breast milk. Eur J Clin Pharmacol 1985;28:357.4007043
9 Nation RL, Hackett LP, Dusci LJ, . Excretion of hydroxychloroquine in human milk. Br J Clin Pharmacol 1984;17:368–9.6712872
10 Costedoat-Chalumeau N, Amoura Z, Aymard G, . Evidence of transplacental passage of hydroxychloroquine in humans. Arthritis Rheum 2002;46:1123–4.11953993
11 Costedoat-Chalumeau N, Amoura Z, Sebbough D, . Electroretinograms of children born to mothers treated with hydroxychloroquine during pregnancy and breast-feeding: Comment on the article by Costedoat-Chalumeau et al. Author reply. Arthritis Rheum 2004;50:3057–8.
12 Cissoko H, Rouger J, Zahr N, . Breast milk concentrations of hydroxychloroquine. Fundam Clin Pharmacol 2010;24 (Suppl. 1):420. doi:10.1111/j.1472-8206.2010.00819.x
13 Liu RJ, Zhang LJ, Mei D, . Excretion of hydroxychloroquine in milk of lactating patients. Pharmacotherapy 2016;36:E261. doi:10.1002/phar.1877
14 Tincani A, Faden D, Lojacono A, . Hydroxychloroquine in pregnant patients with rheumatic disease. Arthritis Rheum 2001;44 (Suppl S9):S397. doi:10.1002/1529-0131(200109)44:9+<::AID-ART428>3.0.CO;2-1
15 Motta M, Tincani A, Faden D, . Antimalarial agents in pregnancy. Lancet 2002;359:524–5.
16 Ikram N, Eudy A, Clowse MEB. Breastfeeding in women with rheumatic diseases. Lupus Sci Med 2021;8:e000491.33832977
17 Li R, Zhang C, Wang H, . Breastfeeding by a mother taking cyclosporine for nephrotic syndrome. Int Breastfeed J 2022;17:72.36253832
18 Reynolds JA, Gayed M, Khamashta MA, . Outcomes of children born to mothers with systemic lupus erythematosus exposed to hydroxychloroquine or azathioprine. Rheumatology (Oxford) 2022;62:1124–35.
19 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105
20 Orefice V, Ceccarelli F, Pirone C, . Breastfeeding in women affected by systemic lupus erythematosus: Rate, duration and associated factors. Lupus 2021;30:913–20.33611966

## Substance Identification

### Substance Name

Hydroxychloroquine

### CAS Registry Number

118-42-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antirheumatic Agents

Antiprotozoal Agents